# Olutasidenib

CASRN: 1887014-12-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of olutasidenib during breastfeeding. Because it is 93% bound to plasma proteins, the amount in milk is likely to be low. However, The manufacturer recommends that the mother not breastfeed during treatment and for 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Olutasidenib

### CAS Registry Number

1887014-12-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Isocitrate dehydrogenase-1 inhibitors